# Ritonavir

CASRN: 155213-67-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ritonavir is excreted into milk in measurable concentrations and low levels can be found in the blood of some breastfed infants. No adverse reactions in breastfed infants have been reported. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. One study measured ritonavir in breastmilk samples from nursing mothers who had been randomized to receive the drug as part of a clinical trial to evaluate maternal-to-child transmission of HIV infection. The dosages, dosage regimens and times of breastmilk sample collection times were not reported. Ritonavir was not detected in any of 60 breastmilk samples.[3]

Nine mothers who were receiving lopinavir 400 mg plus ritonavir 100 mg twice daily as part of a combination antiretroviral regimen provided a total of 23 milk samples at birth, 1 month, 3 months and/or 6 months postpartum. Milk samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous dose. The median breastmilk ritonavir concentration was 79 mcg/L (range 31 to 193 mcg/L).[4]

Thirty women were studied at 6, 12 or 24 weeks postpartum (10 at each time). Each mother was taking zidovudine 300 mg, lamivudine 150 mg, lopinavir 400 mg, and ritonavir 100 mg twice daily by mouth starting at delivery. On the study day, at a median of 14.9 hours after the previous evening’s dose, maternal plasma and breastmilk samples were obtained prior to the morning dose and 2, 4 and 6 hours after the dose. One hundred twelve of the 121 breastmilk samples contained detectable quantities (10 mcg/L or greater) of ritonavir, with a median breastmilk concentration of 79 mcg/L over the 6 hours.[5]

Nine HIV-positive women about to undergo cesarean section received 3 doses of lopinavir 200 mg, ritonavir 150 mg, zidovudine 300 mg, lamivudine 50 mg at 3 hour intervals before the procedure. Breastmilk samples were collected at a mean of 25 hours postpartum. In the 8 women where it was quantified, the average milk concentration of ritonavir was 240 mcg/L (range 98 to 402 mcg/L).[6]

Eight women who were taking nirmatrelvir-ritonavir and had donated milk samples to a breastmilk repository had their milk analyzed for nirmatrelvir. All were taking a ritonavir dose of 100 mg twice daily and reported taking milk samples at 0, 1, 2, 4, 6, 8, 10, and 12 hours after a dose. The peak ritonavir concentration in milk occurred at 4 hours after the dose was 55.6 mcg/L and the average concentration was 33.5 mcg/L. This translated into a daily infant dose of 0.005 mg/kg or a relative infant dose of 0.19%.[7]

Eight healthy lactating women who were at least 12 weeks postpartum were administered 3 oral doses of 300 mg of nirmatrelvir and 100 mg of ritonavir every 12 hours. The geometric mean peak milk concentration was 72 mcg/L, and the median half-life in milk was 3.17 hours. The mean daily amount ritonavir recovered in breastmilk was 0.027 mg, representing 0.014% of the corresponding administered daily maternal dose (unadjusted for weight). The estimated daily infant dosage (assuming average milk consumption of 150 mL/kg/day), was 0.006 mg/kg or 1 0.19% of the maternal dose for ritonavir.[8]

Fourteen breastfeeding women with HIV were receiving ritonavir 100 mg and atazanavir 300 mg daily, as part of a multi-drug regimen. Milk samples were collected at three postpartum visits: 5 to 9 days postpartum, 2 to 12 weeks postpartum, and 16 to 24 weeks postpartum. The median breastmilk ritonavir concentration was 13.6 mcg/L (IQR 2.12, 24.3 mcg-L) for ritonavir, with a median time of 17.2 hours (IRQ 14.5, 18.9 hours) between dose and sample collection. The median ritonavir RID was 0.12% (maximum 1.10%).[9]

Infant Levels. Breastfed infants of 9 mothers who were receiving lopinavir 400 mg plus ritonavir 100 mg twice daily as part of a combination antiretroviral regimen had a total of 6 blood samples analyzed at 1 month, 3 months and/or 6 months postpartum. Samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous maternal dose and a median of 30 minutes (range 20 to 60 minutes) after the previous nursing. The infants’ median ritonavir plasma concentration was 7 mcg/L (range 0 to 138 mcg/L), which was a median of 12% (range 11 to 40%) of the maternal serum concentration.[4]

Ritonavir was measured in 117 breastfed (90% exclusive) infants whose mothers were taking lopinavir plus ritonavir for HIV infection during pregnancy and postpartum. At 8 and 12 weeks postpartum, none of the infants had detectable ritonavir in their plasma; 91% of infants had detectable ritonavir in their hair samples at 12 weeks postpartum at a mean concentration of 0.15 ng/mg of hair (range 0.03 to 0.42 ng/mg). The authors interpreted the results to mean that infants receive negligible exposure to ritonavir during breastfeeding.[10]

Thirty nursing mothers were studied at 6, 12 or 24 weeks postpartum (10 at each time). Each mother was taking ritonavir 100 mg twice daily by mouth starting at delivery. Infant plasma samples were obtained before their mother’s first dose and at 2, 4 and 6 hours after the mother’s dose. Infants were allowed to breastfeed ad libitum during the study period. Ritonavir was undetectable (<10 mcg/L) in all of the 115 infant plasma samples.[5]

### Effects in Breastfed Infants

Fourteen exclusively breastfeeding women with HIV were receiving ritonavir 100 mg and atazanavir 300 mg daily, as part of a multi-drug regimen. Thirteen of fourteen infants received nevirapine-based prophylaxis. No infant experienced a Grade 3 or higher event or serious adverse event. Three infants (21%) experienced Grade 2 adverse events: one with viral rhinitis (16.6 weeks), one with a chest abscess (7.4 weeks), and one with pruritus and papular rash (4.9 weeks). None of the reported events were considered to be related to atazanavir-ritonavir exposure via breastmilk.[9]

### Effects on Lactation and Breastmilk

Gynecomastia has been reported among men receiving highly active antiretroviral therapy. Gynecomastia is unilateral initially, but progresses to bilateral in about half of cases. No alterations in serum prolactin were noted and spontaneous resolution usually occurred within one year, even with continuation of the regimen.[11-13] Some case reports and in vitro studies have suggested that protease inhibitors might cause hyperprolactinemia and galactorrhea in some male patients,[14,15] although this has been disputed.[16] The relevance of these findings to nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Rezk NL, White N, Bridges AS, . Studies on antiretroviral drug concentrations in breast milk: Validation of a liquid chromatography-tandem mass spectrometric method for the determination of 7 anti-human immunodeficiency virus medications. Ther Drug Monit 2008;30:611-9.18758393
4 Palombi L, Pirillo MF, Andreotti M, . Antiretroviral prophylaxis for breastfeeding transmission in Malawi: drug concentrations, virological efficacy and safety. Antivir Ther 2012;17:1511-9.22910456
5 Corbett AH, Kayira D, White NR, . Antiretroviral pharmacokinetics in mothers and breastfeeding infants from 6 to 24 weeks post-partum: Results of the BAN Study. Antivir Ther 2014;19:587-95.24464632
6 Ramírez-Ramírez A, Sanchez-Serrano E, Loaiza-Flores G, . Simultaneous quantification of four antiretroviral drugs in breast milk samples from HIV-positive women by an ultra-high performance liquid chromatography tandem mass spectrometry (UPLC-MS/MS) method. PLoS One 2018;13:e0191236.29351333
7 Dai J, Fuquay T, Huseman S, . Low nirmatrelvir and ritonavir exposure through breastmilk: Analyzing milk concentrations and infant risk. Clin Pharmacol Ther 2024;116:1217-21.38923506
8 Gerhart J, Cheruvu N, Pelletier K, . A phase 1 multiple-dose, open-label, pharmacokinetic study of nirmatrelvir/ritonavir in healthy lactating women. Clin Transl Sci 2026;19:e70552.42012328
9 Barr EA, Pinilla M, Momper JD, . Breastmilk transfer and infant exposure to atazanavir/ritonavir in breastfeeding women with HIV: results from IMPAACT 2026. Front Reprod Health 2026;8:1892081.42666560
10 Gandhi M, Mwesigwa J, Aweeka F, . Hair and plasma data show that lopinavir, ritonavir, and efavirenz all transfer from mother to infant in utero, but only efavirenz transfers via breastfeeding. J Acquir Immune Defic Syndr 2013;63:578-84.24135775
11 García-Benayas T, Blanco F, Martin-Carbonero L, . Gynecomastia in HIV-infected patients receiving antiretroviral therapy. AIDS Res Hum Retroviruses 2003;19:739-41.14585204
12 Pantanowitz L, Evans D, Gross PD, . HIV-related gynecomastia. Breast J 2003;9:131-2.12603389
13 Evans DL, Pantanowitz L, Dezube BJ, . Breast enlargement in 13 men who were seropositive for human immunodeficiency virus. Clin Infect Dis 2002;35:1113-9.12384846
14 Hutchinson J, Murphy M, Harries R, . Galactorrhoea and hyperprolactinaemia associated with protease-inhibitors. Lancet 2000;356:1003-4.11041407
15 Orlando G, Brunetti L, Vacca M. Ritonavir and saquinavir directly stimulate anterior pituitary prolactin secretion, in vitro. Int J Immunopathol Pharmacol 2002;15:65-8.12593790
16 Montero A, Bottasso OA, Luraghi MR, . Galactorrhoea, hyperprolactinaemia, and protease inhibitors. Lancet 2001;357:473-5.

## Substance Identification

### Substance Name

Ritonavir

### CAS Registry Number

155213-67-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Protease Inhibitors